# Aficamten

CASRN: 2364554-48-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of aficamten during breastfeeding. Because the drug is 90% bound to plasma proteins, amounts in milk are likely to be low. If a mother requires aficamten, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Aficamten

### CAS Registry Number

2364554-48-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cardiovascular Agents